# Lofexidine

CASRN: 31036-80-3

## Drug Levels and Effects

### Summary of Use during Lactation

No data are available in nursing mothers on the excretion into milk or safety of lofexidine in nursing mothers. A computer model predicted a maximum relative infant dose of about 3%, which should be acceptable. Although it is not contraindicated during breastfeeding, lofexidine should be used with caution until more data are available. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A pharmacokinetic model was designed using in vitro-in vivo techniques that were then used to create a physiologically based pharmacokinetic model of lofexidine. A simulation of administering a dose of lofexidine to nursing mothers resulted in peak milk levels of about 4 mcg/L with a single 1.2 mg dose and 6 mcg/L with a single 2 mg dose assuming milk pH to be 6.8. Excretion was pH-sensitive, with levels dropping by over 90% at a pH of 7.[1] Using the peak level from a 2 mg maternal dose, the worst-case relative infant dose would be about 3%.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Buprenorphine, Methadone

### References

1 Dash SK, Rahman MA, Yi B, et al. Microfluidic blood-milk barrier and physiologically based pharmacokinetic model to predict lofexidine secretion into breast milk. J Pharm Sci 2025;114:103767.40113090

## Substance Identification

### Substance Name

Lofexidine

### CAS Registry Number

31036-80-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Alpha-2 Receptor Agonists,

Narcotic Antagonists